# Brotizolam

CASRN: 57801-81-7

## Drug Levels and Effects

### Summary of Use during Lactation

Brotizolam is not approved for marketing in the United States by the U.S. Food and Drug Administration. Very little information is available on the passage of brotizolam into milk, although amounts in milk appear to be very low. An alternate drug might be preferred, especially while nursing a newborn or preterm infant. If brotizolam is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. A woman who was taking oral brotizolam 0.25 mg daily donated milk samples between 3 and 6 days postpartum 1 to 1.5 hours after a dose at the estimated peak serum concentration and just before a dose. She had a peak milk level of 0.589 mcg/L. Her trough milk levels was less than the lower limit of quantification of 0.25 mcg/L.[1]

A woman with bipolar disorder received brotizolam 0.25 mg, alprazolam 0.4 mg, and trazodone 50 mg daily during pregnancy and postpartum. She also received sertraline 25 mg daily, which was increased gradually to 100 mg twice daily. On day 5 postpartum, the brotizolam concentration in milk was 0.12 mcg/L at 7.1 hours after the dose. Milk samples at 16.4, 19.2 and 29 hours after the dose had undetectable (<0.05 mcg/L) levels of brotizolam.[2]

A woman with dissociative disorder and persistent dysthymic depression was treated during pregnancy with brotizolam 0.25 mg daily, propericiazine 10 mg daily, and zolpidem 5 mg daily. Zolpidem was discontinued at week 28 and sulpiride 100 mg daily was begun at week 33. On postpartum day 5, alprazolam 0.4 mg daily was begun. Milk samples were taken at 7.5 and 11.5 hours after the previous dose on day 9 postpartum. Brotizolam was undetectable (<0.1 mcg/L) in both milk samples.[3]

A study of women taking brotizolam found that with an average blood level of 5.12 mcg/L, the milk level of brotizolam was undetectable (low limit of assay not stated).[4]

Infant Levels. A woman with bipolar disorder received brotizolam 0.25 mg, alprazolam 0.4 mg, and trazodone 50 mg daily during pregnancy and postpartum. She also received sertraline 25 mg daily, which was increased gradually to 100 mg twice daily. The infant was admitted to the neonatal ICU and was given 40 to 100 mL of pumped breastmilk plus 100 to 220 mL of formula daily. Brotizolam was undetectable (<0.05 mcg/L) in infant serum on 5 occasions over the first 5 days postpartum.[2]

### Effects in Breastfed Infants

A woman with bipolar disorder received brotizolam 0.25 mg, alprazolam 0.4 mg, and trazodone 50 mg daily during pregnancy and postpartum. She also received sertraline 25 mg daily, which was increased gradually to 100 mg twice daily. The infant was admitted to the neonatal ICU for neonatal abstinence syndrome and was discharged on day 8 of life. The mother exclusively breastfed her infant for 3 months while taking brotizolam 0.25 mg daily, sertraline 50 mg twice daily, alprazolam 0.4 mg daily and zolpidem 10 mg daily. No drug-related adverse effects were detected at the 1-, 3-, or 6-month checkups.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lorazepam, Oxazepam, Temazepam

### References

1 Nishimura A, Furugen A, Umazume T, et al. Benzodiazepine concentrations in the breast milk and plasma of nursing mothers: Estimation of relative infant dose. Breastfeed Med 2021;16:424-31.33449825
2 Saito J, Ishii M, Miura Y, et al. Brotizolam during pregnancy and lactation: Brotizolam levels in maternal serum, cord blood, breast milk, and neonatal serum. Breastfeed Med 2021;16:579-82.33666494
3 Saito J, Tachibana Y, Wada YS, et al. Transfer of brotizolam, periciazine, and sulpiride in cord blood and breast milk, and alprazolam in breast milk: A case report. J Pharm Health Care Sci 2022;8:10.35361275
4 Fujii K, Maekawa M, Tsuji S, et al. Drug concentrations in blood and breast milk while taking psychotropic drugs-preliminary study. Int J Neuropsychopharmacol 2025;28:i185. doi:10.1093/ijnp/pyae059.321

## Substance Identification

### Substance Name

Brotizolam

### CAS Registry Number

57801-81-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Hypnotics and Sedatives

Anti-Anxiety Agents

Benzodiazepines